# Olodaterol

CASRN: 868049-49-4

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published data exist on the use of olodaterol during lactation, data from the related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1] The authors of several reviews agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[2-5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Formoterol, Salmeterol

### References

1 Lindberg C, Boréus LO, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91 6586490
2 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8.8937369
3 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8 11254828
4 Taddio A, Ito S. Drugs and breast-feeding. In, Koren G, ed. Maternal-fetal toxicology. A clinician's guide. 3rd ed. New York. Marcel Dekker. 2001:177-32.
5 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758

## Substance Identification

### Substance Name

Olodaterol

### CAS Registry Number

868049-49-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Beta Adrenergic Agonists

Bronchodilator Agents